# Ticarcillin

CASRN: 34787-01-4

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that ticarcillin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Ticarcillin is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Only trace levels of ticarcillin were detected for 6 hours after single 1 gram intramuscular doses in 3 women in one study,[1,2] and 5 women in another early study.[3]

After ticarcillin doses of 5 grams intravenously three times a day in 10 women, milk levels averaged 2 to 2.5 mg/L. By 12 hours after the last dose, ticarcillin was undetectable in the milk. The total daily intake of a breastfed infant would be negligible.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60 6743732
2 Matsuda S, Tanno M, Kashiwakura T, et al. Laboratory and clinical use of ticarcillin. Chemotherapy (Tokyo) 1977;25:2924-31
3 Cho N, Nakayama T, Uehara K, et al. Laboratory and clinical evaluation of ticarcillin in the field of obstetrics and gynecology. Chemotherapy (Tokyo) 1977;25:2911-23
4 von Kobyletzki D, Dalhoff A, Lindemeyer H, et al. Ticarcillin serum and tissue concentrations in gynecology and obstetrics. Infection 1983;11:144-9 6885173

## Substance Identification

### Substance Name

Ticarcillin

### CAS Registry Number

34787-01-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins